# Amifampridine

CASRN: 54-96-6

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of amifampridine during breastfeeding on the presence of amifampridine or the 3-N-acetyl-amifampridine metabolite in breastmilk. If amifampridine is required by the mother, it is not a reason to discontinue breastfeeding, but the infant should be carefully monitored for excessive crying or fussiness, adequate weight gain, and developmental milestones.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Amifampridine

### CAS Registry Number

54-96-6

### Drug Class

- Breastfeeding
- Lactation
- Neuromuscular Agents
- Potassium Channel Blockers